# Ethacrynic Acid

CASRN: 58-54-8

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of ethacrynic acid during breastfeeding and because intense diuresis might decrease lactation, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. Low doses of ethacrynic acid may not suppress lactation.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Ethacrynic acid was reportedly used successfully to suppress lactation in 6 postpartum women who did not want to breastfeed and to decrease the intensity of milk production in another.[1] The added contribution of the diuretic to the other measures, which are effective in suppressing lactation, has not been studied. No data exist on the effects of loop diuretics on established, ongoing lactation.

### Alternate Drugs to Consider

Chlorothiazide, Hydrochlorothiazide

### References

1 Mahon R, Dubecq J, Baudet E, et al. (1968). Bull Fed Soc Gynecol Obstet Lang Fr.

## Substance Identification

### Substance Name

Ethacrynic Acid

### CAS Registry Number

58-54-8

### Drug Class

Breast Feeding

Lactation

Antihypertensive Agents

Loop Diuretics